# Anidulafungin

CASRN: 166663-25-8

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of anidulafungin in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants. If anidulafungin is required by the mother, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. A postpartum woman was treated with intravenous anidulafungin 100 mg once daily for 14 days. Nine milk samples were obtained over the first 32 hours after the drug was discontinued. Five hours after drug was discontinued, the milk concentration of anidulafungin was 0.24 mg/L. The concentration decreased to 0.12 mg/L at 32 hours after the dose and was undetectable in milk at 38 and 48 hours after the dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A postpartum woman was treated with intravenous anidulafungin 100 mg once daily for 14 days. She withheld breastfeeding until the second day after completing her 14-day course of therapy. Her milk had detectable anidulafungin levels until 32 hours after the last dose. No gastrointestinal or other adverse effects were seen in the infant up to 72 hours after the last dose of drug.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Fluconazole, Miconazole

### References

1 Eijsink JFH, Wieringa A, Vries-Koenjer MLM, Ter Horst PGJ. Anidulafungin levels in breast milk after cessation of treatment: A case report. Breastfeed Med 2024;19:134-6.38174985

## Substance Identification

### Substance Name

Anidulafungin

### CAS Registry Number

166663-25-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antifungal Agents

Echinocandins